# Tacrolimus

CASRN: 104987-11-3

## Drug Levels and Effects

### Summary of Use during Lactation

The amounts of systemically administered tacrolimus are low in breastmilk and do not adversely affect the breastfed infant. Tacrolimus has been used extensively by nursing mothers and United States and European expert guidelines consider tacrolimus to be acceptable during breastfeeding.[1-3] Exclusively breastfed infants should be monitored if this drug is used during lactation, possibly including measurement of serum levels to rule out toxicity if there is a concern.

Topical tacrolimus presents a low risk to the nursing infant because it is poorly absorbed after topical application and peak blood concentrations are less than 2 mcg/L in most patients. Ensure that the infant’s skin does not come into direct contact with the areas of skin that have been treated. Current guidelines allow topical tacrolimus to be applied to the nipples just after nursing, with the nipples cleaned gently before nursing.[4,5] Only water-miscible cream or gel products should be applied to the breast or nipple because ointments may expose the infant to high levels of mineral paraffins via licking,[5] so pimecrolimus cream may be preferable to tacrolimus ointment for nipple application.

### Drug Levels

Maternal Levels. Random tacrolimus colostrum levels in 10 samples from 6 mothers averaged 1.7 mcg/L (range 0.3 to 1.9 mcg/L) which was about 50% of maternal serum levels. Tacrolimus dosages in these mothers were not reported.[6]

One mother taking 3 mg twice daily (0.1 mg/kg per day), had a peak milk level of 0.57 mcg/L one hour after the dose. The half-life in milk was estimated to be 12.85 hours. The authors estimated that her breastfed infant would receive 0.06% of the maternal weight-adjusted dosage or 0.06 mcg/kg daily, which is 0.03 to 0.04% of the oral starting dosage for pediatric patients.[7]

One mother who had been taking tacrolimus for a kidney transplant 5 years earlier was 3 months postpartum and exclusively breastfeeding her infant. She had been taking a dosage of 2 mg orally twice daily (0.05 mg/kg per day) for at least 2 months. She was also taking atenolol 100 mg, azathioprine 100 mg, diltiazem 180 mg, furosemide 20 mg, and prednisone 5 mg daily. Milk samples obtained over a 12-hour dosage interval found little change throughout the day, with the highest levels of 2.1 mcg/L at 4 and 8.5 hours after the dose. The average milk concentration was 1.8 mcg/L. The authors calculated that an exclusively breastfed infant would receive a daily dosage of 0.27 mcg/kg which is about 0.5% of the maternal weight-adjusted dosage and less than 0.2% of the pediatric dosage for organ transplant rejection.[8]

Eleven women who took tacrolimus (exact dosages not specified but assumed to be 6 mg daily) during pregnancy and postpartum donated 22 breastmilk samples (times unspecified) for analysis. The median breastmilk concentration was 0.8 mcg/L (range 0.1 to 1.6 mcg/L). Two women took samples before and 4 or more hours after a dose; no difference in milk levels was seen. The authors estimated that the maximum dosage that an exclusively breastfed infant would receive would be 0.56 mcg daily, equivalent to 0.23% of the maternal weight-adjusted dosage. Additionally, comparing infants who were breastfed to those who were not, the serum tacrolimus concentrations fell at about the same rate over the first 2 weeks postpartum, regardless of breastfeeding status, indicating that breastfeeding did not prolong infant tacrolimus levels.[9]

Eleven breastmilk samples were obtained via breast pump over a 12-hour dosage interval in a nursing mother who was 45 weeks postpartum and receiving tacrolimus 1.5 mg twice daily after a liver transplant. The peak tacrolimus milk level of 1.11 mcg/L occurred 6 hours after the dose. The average tacrolimus level in milk was 0.93 mcg/L. The milk concentration of the active metabolite, 13-demethyltacrolimus, averaged 0.03 mcg/L (range 0.01 to 0.04 mcg/L). The authors estimated that a fully breastfed infant would receive 0.14 mcg/kg daily or 0.3 % of the maternal weight-adjusted dosage.[10]

Fourteen mothers with organ transplants donated 5 colostrum samples on day 2, 3 or 4 postpartum before a dose, and 2, 4, 6 and 8 hours after a dose of tacrolimus. Tacrolimus dosages ranged from 4 to 14 mg daily in 2 divided doses and were adjusted to attain maternal serum levels between 5 and 10 mcg/L. The highest colostrum levels were seen at 8 hours after the dose and averaged 3.2 mcg/L for tacrolimus, 0.56 mcg/L for 13-O-desmethyltacrolimus. The metabolite 15-O-desmethyltacrolimus reached its highest mean colostrum levels of 0.29 mcg/L at 6 hours after the dose. The metabolite 31-O-desmethyltacrolimus was not detectable in colostrum. None of the infants were breastfed, but the mean daily dosages calculated to be ingested by the breastfed infants were 151.4 ng/kg of tacrolimus, 23.80 ng/kg for 13-O-desmethyltacrolimus, and 13.25 for 15-O-desmethyltacrolimus.[11]

Thirteen Japanese women with systemic lupus erythematosus were treated with an average tacrolimus dose of 3.2 mg (range 2 to 5.5 mg) once daily. Milk samples were obtained immediately prior to a dose, and 2 and 12 hours after the dose. Median levels were 3 mcg/L for the trough, 3.8 mcg/L at 2 hours, and 3.7 mcg/L at 12 hours. The median weight-adjusted percent of maternal dosage was reportedly 0.18% (range 0.12 to 0.35%), although the exact method of calculation was not clearly specified.[12] Note that the data table and the text disagree on units of measurement. This paper would only be consistent with other papers if units were in ng/mL (mcg/L).

A woman was taking tacrolimus 1.5 mg twice daily during pregnancy and postpartum. Four days after delivery, her milk tacrolimus level was 1.1 mcg/L at an unspecified time after the dose. On day 21 postpartum, milk levels were 1.4 mcg/L at the time of the morning dose, 1.3 mcg/L at 4 hours after the dose, 1.6 mcg/L at 8 hours after the dose, and 1.4 mcg/L at 12 hours after the dose. The authors estimated that a fully breastfed infant would receive 0.4% of the mother’s weight-adjusted dosage.[13]

A woman with a heart transplant took tacrolimus alone throughout pregnancy and postpartum while breastfeeding her infant (extent not stated) for one year. At one month of age, her tacrolimus serum concentration was therapeutic at 8.9 mcg/L and a simultaneous milk sample was 0.5 mcg/L, although the sample timing with respect to her tacrolimus dose was not stated.[14]

Two nursing mothers were taking tacrolimus and donated milk samples. The first collected 5 samples on day 14 postpartum while taking 0.5 to 0.6 mg/kg daily. The second collected 9 samples at 2 months postpartum while taking 0.2 mg/kg daily. Milk tacrolimus concentration ranged from 0.65 to 2.36 mcg/L in the first patient and 0.41 to 1.46 mcg/L in the second patient. Estimated RIDs were 0.05% for patient 1 and 0.04% for patient 2.[15]

Tacrolimus concentrations in breastmilk were measured over time in two mothers taking a sustained-release formulation in doses of 3 and 7 mg daily. The maximum peak milk concentrations were 1.33 ng/mL and 1.24 ng/mL, corresponding to RIDs of 0.2% and 0.19%, respectively.[16]

Infant Levels. Four breastfed (3 exclusive, 1 partial) infants whose mothers took tacrolimus during breastfeeding had serum tacrolimus concentrations measured between day 15 and 27 of age. The mothers’ mean daily tacrolimus dosage during breastfeeding was 9.6 mg daily (range 4.5 to 15 mg daily). Tacrolimus was undetectable (<1.9 mcg/L) in all of the infants.[17]

A woman was taking tacrolimus 6 mg twice daily during pregnancy to prevent rejection of a small intestine transplant. Her dosage was adjusted to maintain an optimal tacrolimus blood level postpartum, although the exact dosage was not stated. She breastfed (extent not stated) her infant and at 1 week of age, the infant’s tacrolimus blood level was less than 1 mcg/L.[18]

Twelve infants were exclusively breastfed by mothers taking tacrolimus (exact dosages not specified) during pregnancy and postpartum. Twenty-four infant blood samples were obtained from the infants at various times. The median infant blood tacrolimus concentration was 1.3 mcg/L (range 0.0 to 4.0 mcg/L). In infants in whom serial blood levels were obtained, levels declined at about 15% daily. Blood tacrolimus levels in breastfed infants were no higher than those in 3 additional infants who were not breastfed. Eight breast-fed infants with serial blood samples had undetectable (<0.1 mcg/L) tacrolimus blood levels at a median of day 14 (interquartile range day 11 to 22) postpartum.[9]

Two mothers with systemic lupus erythematosus were reported who have taken tacrolimus during pregnancy and lactation. One took tacrolimus 3 mg and prednisolone 40 mg daily and the other took tacrolimus 3 mg and prednisolone 30 mg daily during breastfeeding. The infants’ blood tacrolimus levels measured 1 hour after breastfeeding were 0.2 mcg/L in the first infant at 10 days of age, and 0.5 mcg/L in the second at 7 days of age.[19]

Thirteen infants were breastfed (extent not stated) by mothers with systemic lupus erythematosus and were treated with an average tacrolimus dose of 3.2 mg (range 2 to 5.5 mg) once daily. Infant blood samples were obtained 2 to 4 hours after a maternal dose at 1 to 3 months of age, but the time of the prior breastfeeding was not stated. All infants had undetectable (lower limit of detection not stated) blood tacrolimus levels.[12]

A woman was taking tacrolimus 1.5 mg twice daily during pregnancy and postpartum. Immediately after delivery (7 hours after the prior dose), the infant’s blood tacrolimus concentration was 3 mcg/L. The infant was in the neonatal ICU and fed 40 to 80 mL of breastmilk and 420 to 500 mL of formula daily. On day 4 of life, the infant’s blood tacrolimus concentration was 1.5 mcg/L; on day 21 postpartum, tacrolimus was undetectable (<0.5 mcg/L) in in the infant’s blood.[13]

A woman with a heart transplant took tacrolimus alone throughout pregnancy and postpartum while breastfeeding her infant (extent not stated). At one month of age, a maternal serum tacrolimus concentration was 8.9 mcg/L and the infant’s serum concentration was 0.1 mcg/L.[14]

Sixteen infants whose mothers were taking tacrolimus during pregnancy were fed a mixed diet or exclusively breastfed. By 1 month of age, tacrolimus concentrations in all infants’ blood were below the detection limit.[16]

### Effects in Breastfed Infants

One infant was exclusively breastfed during maternal tacrolimus therapy throughout gestation to at least 2.5 months of age at which time the infant was developing normally physically and neurologically. An ultrasound examination of the infant’s thymus was normal.[7]

The National Transplantation Pregnancy Registry reported data gathered from 1991 to 2011 on mothers who breastfed their infants following organ transplantation. A total of 68 mothers with transplants (mostly kidney or liver) used tacrolimus while breastfeeding a total of 83 infants. Duration of nursing ranged from 1 week to 1.5 years and follow-up of the children ranged from weeks to 16 years. There were no reports of problems in any of the infants or children.[20] A review of the Transplant Pregnancy Registry International database from 1999 to 2024 found that 516 mothers with transplants had breastfed their infants for at least 4 weeks while taking tacrolimus.[21]

The breastfed infants of six women who took tacrolimus during pregnancy for organ transplantation were breastfed (4 exclusive, 2 partial) for 45 to 180 days and followed for periods of 2 to 30 months. The mothers’ mean daily tacrolimus dosage during breastfeeding was 9.6 mg daily (range 4.5 to 15 mg daily). Four mothers were also taking azathioprine 100 to 150 mg daily, one was taking diltiazem, and one was taking prednisolone 15 mg and aspirin 75 mg daily. None of the infants had any clear tacrolimus-related side effects, although one had transient thrombocytosis that resolved despite continued breastfeeding. Developmental milestones were normal and no pattern of infections was noted.[17]

Two mothers with systemic lupus erythematosus were reported who took tacrolimus 3 mg daily during pregnancy and lactation as well as prednisolone 30 or 40 mg daily. Three years after birth, both children were healthy. The durations of lactation were not stated.[19]

In a case series of women who had liver transplants over a 25-year period, one woman breastfed (extent not stated) her infant while taking tacrolimus. No neonatal complications were noted.[22]

A mother with a liver transplant was maintained on belatacept 10 mg/kg monthly, slow-release tacrolimus (Envarsus and Veloxis) 2 mg daily, azathioprine 25 mg daily, and prednisone 2.5 mg daily. She breastfed her infant for a year (extent not stated). The infant’s growth and cognitive milestones were normal.[23]

An Australian case series reported 3 women with heart transplants who had a total of 5 infants, all of whom were breastfed (extent not stated) during maternal tacrolimus therapy. Daily dosages ranged from 3 to 13 mg daily. No adverse infant effects were reported up to the times of discharge.[24] A woman with rheumatoid arthritis refractory to etanercept took sarilumab 200 mg every two weeks during pregnancy until 37 weeks of gestation. She was also taking prednisolone 10 mg and tacrolimus 3 mg daily. She delivered a healthy infant at 38 weeks of gestation and breastfed her infant. Prednisolone was continued postpartum, tacrolimus was restarted at 7 days postpartum, and sarilumab was restarted at 28 days postpartum. The mother continued to breastfeed until 6 months postpartum. The infant was vaccinated with multiple live vaccines after reaching six months old, including the Bacille-Calmette-Guerin vaccine, with no adverse effects.[25]

A woman with a heart transplant took tacrolimus alone throughout pregnancy and postpartum while breastfeeding her infant (extent not stated) for one year. The child had normal weight gain, normal motor development, and no signs of metabolic disorders or significant infections. The age of the infant at evaluation was not stated.[14]

Following a successful uterus transplant and embryo transfer, a newborn infant was breastfed by a mother taking tacrolimus, azathioprine 150 mg (2 mg/kg), prednisone 5 mg, and enoxaparin 40 mg daily. The tacrolimus dosage was adjusted to achieve a serum concentration of 5 to 7 mcg/L. The mother breastfed (exclusively?) for 8 weeks and weaned over the next 4 weeks. At 15 months, the infant was achieving all developmental milestones.[26]

A small retrospective study in Japan compared the symptoms of infants whose mothers were taking tacrolimus 3 mg daily to the infants of a group of 12 mothers who were taking no medications. The infants in the tacrolimus had a gestational delivery date slightly shorter (37 vs 38.6 weeks) and were primarily breastfeeding, but only one was exclusively breastfed. The women in the control group were all mixed feeding. At the 1-month checkup, none of the side effects reported were serious. The infants of the mothers taking tacrolimus had more vomiting than infants in the control group.[27]

Sixteen infants whose mothers received tacrolimus during pregnancy and postpartum were fed a mixed diet or exclusively breastfed. No serious infections were observed by one month of age

And except for one case of extremely preterm birth, infants received vaccinations according to the routine immunization schedule (in Japan) starting at 2 months of age, and no serious adverse effects were observed.[16]

### Effects on Lactation and Breastmilk

A study in renal transplant patients who were on a tacrolimus-based immunosuppression regimen found that women’s median serum prolactin levels were 14.4 mcg/L compared with women who were not taking tacrolimus (17.6 mcg/L). The difference was statistically significant. Median serum testosterone levels (0.121 vs 0.137 mcg/L) and serum cortisol levels (82.5 vs 105 mg/L) were also significantly lower in the tacrolimus group.[28] The reduced prolactin may be caused by inhibition of the transcription of the human prolactin gene.[29] Not all studies have found a reduction in serum prolactin with tacrolimus.[30] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

(Transplantation) Azathioprine, Cyclosporine; (Topical) Pimecrolimus

### References

1 Sammaritano LR, Bermas BL, Chakravarty EE, . 2020 American College of Rheumatology Guideline for the Management of Reproductive Health in Rheumatic and Musculoskeletal Diseases. Arthritis Rheumatol 2020;72:529-56.32090480
2 Russell MD, Dey M, Flint J, . British Society for Rheumatology guideline on prescribing drugs in pregnancy and breastfeeding: Immunomodulatory anti-rheumatic drugs and corticosteroids. Rheumatology (Oxford) 2023;62:e48-e88.36318966
3 Rüegg L, Pluma A, Hamroun S, . EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025;84:910-26.40287311
4 Vestergaard C, Wollenberg A, Barbarot S, . European task force on atopic dermatitis position paper: treatment of parental atopic dermatitis during preconception, pregnancy and lactation period. J Eur Acad Dermatol Venereol 2019;33:1644-59.31231864
5 Deleuran M, Dézfoulian B, Elberling J, . Systemic anti-inflammatory treatment of atopic dermatitis during conception, pregnancy and breastfeeding: Interdisciplinary expert consensus in Northern Europe. J Eur Acad Dermatol Venereol 2024;38:31-41.37818828
6 Jain A, Venkataramanan R, Fung JJ, . Pregnancy after liver transplantation under tacrolimus. Transplantation 1997;64:559-65.9293865
7 French AE, Soldin SJ, Soldin OP, . Milk transfer and neonatal safety of tacrolimus. Ann Pharmacother 2003;37:815-8.12773068
8 Gardiner SJ, Begg EJ. Breastfeeding during tacrolimus therapy. Obstet Gynecol 2006;107:453-5.16449146
9 Bramham K, Chusney G, Lee J, . Breastfeeding and tacrolimus: Serial monitoring in breast-fed and bottle-fed infants. Clin J Am Soc Nephrol 2013;8:563-7.23349333
10 Zheng S, Easterling TR, Hays K, . Tacrolimus placental transfer at delivery and neonatal exposure through breast milk. Br J Clin Pharmacol 2013;76:988-96.23528073
11 Kociszewska-Najman B, Mazanowska N, Pietrzak B, . Low transfer of tacrolimus and its metabolites into colostrum of graft recipient mothers. Nutrients 2018;10:267.29495430
12 Hiramatsu Y, Yoshida S, Kotani T, . Changes in the blood level, efficacy, and safety of tacrolimus in pregnancy and the lactation period in patients with systemic lupus erythematosus. Lupus 2018; 27:2245-52.30394835
13 Akamine Y, Fujiyama N, Kagaya H, . Tacrolimus concentrations after renal transplantation in a mother-neonate dyad: Maternal, neonatal and breast milk measurements. J Clin Pharm Ther 2021;46:1800-3.34041772
14 Kuczaj A, Danel A, Warwas S, . Toxic milk- should we still be afraid of breastfeeding while on tacrolimus therapy: A case study. J Heart Lung Transplant 2024;43:S631. doi:10.1016/j.healun.2024.02.989
15 Van Neste M, Nauwelaerts N, de Loor H, . Tacrolimus exposure in human milk: Case series from the UmbrelLACT study-a contribution from the ConcePTION project. Neurotoxicol Teratol 2025;109 (Suppl 2):25. doi:10.1016/j.ntt.2025.107515
16 Koinuma S, Goto M, Fujioka I, . Immune function and immunization safety in breastfed infants born to liver transplant recipients receiving tacrolimus, including sustained-release formulations. Neurotoxicol Teratol 2026;116:35. doi:10.1016/j.ntt.2026.107616
17 Gouraud A, Bernard N, Millaret A, . Follow-up of tacrolimus breastfed babies. Transplantation 2012;94:e38-40.22996303
18 Gómez-Lobo V, Landy HJ, Matsumoto C, . Pregnancy in an intestinal transplant recipient. Obstet Gynecol 2012;120 (2 Pt 2):497-500.22825278
19 Izumi Y, Miyashita T, Migita K. Safety of tacrolimus treatment during pregnancy and lactation in systemic lupus erythematosus: A report of two patients. Tohoku J Exp Med 2014;234:51-6.25175032
20 Thiagarajan KM, Arakali SR, Mealey KJ, . Safety considerations: Breastfeeding after transplant. Prog Transplant 2013;23:137-46.23782661
21 Coscia LA, Kliniewski D, Rao S, . Breastfeeding after transplantation: 25 year review (1999-2024). Am J Transplant 2025;25:S772. doi:10.1016/j.ajt.2025.07.1820
22 Nure E, Pascale MM, Frongillo F, . Pregnancy after liver transplant: Neonatal outcomes and long-term maternal follow-up. Transplant Proc 2019;51:2948-51.31627912
23 Klintmalm GB, Gunby RT, Jr. Successful pregnancy in a liver transplant recipient on belatacept. Liver Transpl 2020;26:1193-4.32337853
24 Boyle S, Sung-Him Mew T, Lust K, . Pregnancy following heart transplantation: A single centre case series and review of the literature. Heart Lung Circ 2021;30:144-53.33162367
25 Mizutani S, Okunishi Y, Tamada T, . A woman with rheumatoid arthritis who successfully delivered a healthy child with continuous administration of sarilumab throughout pregnancy. Intern Med 2023;62:633-6.35871593
26 Deans R, Gerstl B, Shand AW, . The first live term birth following uterus transplantation in Australia. Med J Aust 2025;223:404-9.40406819
27 Yashima K, Obara T, Matsuzaki F, . Safety of tacrolimus during lactation: An exploratory retrospective analysis in a small Japanese cohort. Int Breastfeed J 2026;21:29.41654959
28 Szypulska-Koziarska D, Aleksandra Wilk A, Marchelek-Myśliwiec M, . Tacrolimus-based immunosuppressive therapy influences sex hormone profile in renal-transplant recipients—A research study. Biology (Basel) 2021;10:709.34439942
29 Wera S, Belayew A, Martial JA. Rapamycin, FK506 and cyclosporin A inhibit human prolactin gene expression. FEBS Lett 1995;358:158-60.7530217
30 Mack-Shipman LR, Ratanasuwan T, Leone JP, . Reproductive hormones after pancreas transplantation. Transplantation 2000;70:1180-3.11063337

## Substance Identification

### Substance Name

Tacrolimus

### CAS Registry Number

104987-11-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunosuppressive Agents

Dermatologic Agents